# Eplerenone

CASRN: 107724-20-9

## Drug Levels and Effects

### Summary of Use during Lactation

Data from one mother-infant pair indicate that eplerenone is poorly excreted into breastmilk. Until more data are available, eplerenone should be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. A woman with primary aldosteronism was receiving eplerenone 50 mg (0.79 mg/kg) once daily during pregnancy and postpartum. On postpartum day 7, eplerenone breastmilk concentrations were measured at 1, 1.5, and 11.5 hours after the dose. Eplerenone milk concentrations were 0, 104.1, and 61.3 mcg/L, respectively. On postpartum day 35, eplerenone milk concentrations were measured at 1, 4, 6.5, 13.5, 18.5, and 22 hours after the dose. Eplerenone milk concentrations were 130.2, 161.2, 55.8, 6.0, 0.7, and 0.3 mcg/L, respectively. The authors calculated a maximum daily infant dose of eplerenone, based on the maximum detected eplerenone concentration in breastmilk, to be 0.024 mg/kg daily, which corresponds to a weight-adjusted dosage of 3% relative to the maternal dosage.[1] The average daily and relative dosages would be considerably less.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with primary aldosteronism was receiving eplerenone 50 mg once daily (0.79 mg/kg daily) during pregnancy and postpartum. Her infant was partially breastfed for 3 months, with over 50% of nutrition from breastmilk. The infant developed normally and had no detectable adverse drug effects at the 1- or 3-month checkups.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Spironolactone

### References

1 Saito J, Mito A, Yakuwa N, et al. (2021). Eplerenone levels in maternal serum, cord blood, and breast milk during pregnancy and lactation. Hypertens Res.

## Substance Identification

### Substance Name

Eplerenone

### CAS Registry Number

107724-20-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Mineralocorticoid Receptor Antagonists